# Sucralose

CASRN: 56038-13-2

## Drug Levels and Effects

### Summary of Use during Lactation

Sucralose has been found in the breastmilk of some nursing mothers who report consuming artificially sweetened beverages and sweetener packets in the past 24 hours and in all women given a sucralose-sweetened drinks. Sucralose is poorly absorbed after oral ingestion and is not found in the plasma of most breastfed infants after maternal ingestion of sucralose. It is not likely to cause immediate adverse effects in breastfed infants or result in a sucralose intake greater than the acceptable daily intake.[1] Ingestion of diet drinks containing low-calorie sweeteners might increase the risk of vomiting in breastfed infants. Some authors note that sucralose in milk might exceed the sweetness threshold in milk and affect intestinal enzymes and the microbiome. They suggest that women may wish to limit the consumption of nonnutritive sweeteners while breastfeeding because their effect on the nursing infants are unknown.[2,3]

### Drug Levels

Maternal Levels. Twenty lactating women completed background questionnaires about breastfeeding and the intake of nonnutritive sweeteners in the prior 24 hours. Each then donated a milk sample that was analyzed for the presence of nonnutritive sweeteners. Sweetener intake was primarily from diet sodas and sweetener packets. Of the 14 women who reported intake of a nonnutritive sweetener, 3 had sucralose detectable in their breastmilk in concentrations ranging from 10 to 40 mcg/L.[2]

Thirty-four women, 14 with normal weight and 20 with obesity, ingested 12 fluid ounces of a caffeine-free diet cola containing 68 mg of sucralose and 41 mg acesulfame potassium after an overnight fast prior to breakfast. Breastmilk samples were taken from the same breast every hour for 6 hours. Sucralose was detectable in breastmilk at baseline before the soda in 21% of women and in all women after the cola. The highest measured sucralose concentrations in breastmilk ranged from 4 to 7388 mcg/L, with one woman having the very high concentration; the median peak was 8 mcg/L. Sucralose first appeared in breastmilk 2 hours after ingestion and the peak concentration milk in outlier occurred at 1 hour after ingestion. For the other women, sucralose concentrations were still rising at 6 hours after ingestion, so the true peak might be higher.[4]

Forty-nine women consumed a beverage containing 75 mg of sucralose. Normal and overweight women were about equally represented in the sample. Breastmilk samples were collected before the beverage and at 30, 60, 120, 180, 240, 300, and 360 minutes after the beverage. No milk samples contained detectable sucralose (<10 mcg/L).[5]

Forty exclusively breastfeeding mothers drank 20 fluidounces of diet cranberry juice drink that contained 95 mg of sucralose. Foremilk was collected 1, 2, 3, 4, 6, 8 and 12 hours after diet beverage ingestion. The average peak milk level of sucralose was 7.2 mcg/L and occurred at a median of 7 hours (range 6 to 12 hours) after the dose. The milk concentration fell with an average half-life of 9.1 hours. The average relative infant dose was 0.04%.[6]

Infant Levels. Forty exclusively breastfeeding mothers drank 20 fluidounces of diet cranberry juice drink that contained 95 mg of sucralose. One blood sample was collected from each of their infants at various times between 1.5 and 14 hours after the maternal ingestion of sucralose. Sucralose was detected (≥ 0.1 mcg/L) in the plasma of only 15 infants. The average of these infants plasma sucralose concentrations was 5 mcg/L.[6]

### Effects in Breastfed Infants

A cross-sectional survey assessed the dietary history of US mothers nursing infants between 11 and 15 weeks of age. The survey was used to estimate the amount of diet soda and fruit drinks consumed by the women. There were no statistically significant differences in infants’ weight or z-scores based on low calorie sweetener exposure. However, infants exposed to low calorie sweetener in milk once or less per week had a statistically significantly higher risk of vomiting than those who were not exposed. Greater exposure was not associated with vomiting. It was not possible to assess the effects of specific sweeteners.[7]

Fifty-nine women who used nonnutritive sweeteners during pregnancy and lactation were classified into quartiles depending on their nonnutritive sweetener and sucralose use. There were no differences in salivary insulin concentrations between the infants of mothers in according to sucralose intake.[8]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Aspartame

### References

1 Bailón Uriza R, Ayala Méndez JA, Cavagnari BM, et al. Non-caloric sweeteners in women of reproductive age - A consensus document. Nutr Hosp 2020;37:211-22 31960692
2 Sylvetsky AC, Gardner AL, Bauman V, et al. Nonnutritive sweeteners in breast milk. J Toxicol Environ Health A 2015;78:1029-32 26267522
3 Rother KI, Sylvetsky AC, Schiffman SS. Non-nutritive sweeteners in breast milk: Perspective on potential implications of recent findings. Arch Toxicol 2015;89:2169-71 26462668
4 Rother KI, Sylvetsky AC, Walter PJ, et al. Pharmacokinetics of sucralose and acesulfame-potassium in breast milk following ingestion of diet soda. J Pediatr Gastroenterol Nutr 2018;66:466-70 29077645
5 Stampe S, Leth-Møller M, Greibe E, et al. Artificial sweeteners in breast milk: A clinical investigation with a kinetic perspective. Nutrients 2022;14:2635 35807817
6 Sylvetsky AC, Kuttamperoor JT, Langevin B, et al. Intergenerational transmission of sucralose and acesulfame-potassium from mothers to their infants via human milk: A pharmacokinetic study. Am J Clin Nutr 2024;120:846–53 39111550
7 Huang Q, Murphy J, Smith ER, et al. Diet beverage intake during lactation and associations with infant outcomes in the infant feeding practices study II. Nutrients 2021;13:3154 34579031
8 Peralta Ortega R, Lilloa G, Abrigo K, et al. Maternal consumption of non-nutritive sweeteners during pregnancy/lactation does not affect salivary insulin levels in children at 6-8 months of age. Andes Pediatrica 2025;96:23-4.doi:10.32641/andespediatr.v96i7.5741

## Substance Identification

### Substance Name

Sucralose

### CAS Registry Number

56038-13-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Artificial Sweeteners

Sweetening Agents